# Oxaliplatin

CASRN: 61825-94-3

## Drug Levels and Effects

### Summary of Use during Lactation

Most sources consider that mothers receiving antineoplastic therapy should not breastfeed, especially with alkylating agents such as oxaliplatin.[1] In one patient, platinum was found in breastmilk for at least 65 days after her last dose. The exact form and toxicity of platinum that might be excreted into breastmilk are not known. The nursing infant would receive any platinum compounds orally rather than intravenously and oral absorption of oral platinum compounds by infants is not known. Chemotherapy may adversely affect the normal microbiome and chemical makeup of breastmilk.[2] Women who receive chemotherapy during pregnancy are more likely to have difficulty nursing their infant. The manufacturer recommends that women should not breastfeed during treatment with oxaliplatin injection and for 3 months after the final dose, which is consistent with findings of platinum in the milk of one patient.

### Drug Levels

Maternal Levels. A lactating patient with stage 3a colorectal cancer received chemotherapy including oxaliplatin 130 mg/sq m (200 mg) infused every 4 weeks. She was also receiving capecitabine 1 gram/sq m twice daily by mouth for the first 2 weeks of the 21-day cycles. The patient was breastfeeding a 7-month-old infant until chemotherapy was begun. Milk platinum concentrations 34 and 65 days after treatment were 7.8 and 10.3 mcg/L, respectively.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A telephone follow-up study was conducted on 74 women who received cancer chemotherapy at one center during the second or third trimester of pregnancy to determine if they were successful at breastfeeding postpartum. Only 34% of the women were able to exclusively breastfeed their infants, and 66% of the women reported experiencing breastfeeding difficulties. This was in comparison to a 91% breastfeeding success rate in 22 other mothers diagnosed during pregnancy, but not treated with chemotherapy. Other statistically significant correlations included: 1. mothers with breastfeeding difficulties had an average of 5.5 cycles of chemotherapy compared with 3.8 cycles among mothers who had no difficulties; and 2. mothers with breastfeeding difficulties received their first cycle of chemotherapy on average 3.4 weeks earlier in pregnancy. Of the 3 women who received a regimen containing the similar drug, cisplatin, 1 had breastfeeding difficulties.[4]

### References

1 Pistilli B, Bellettini G, Giovannetti E, et al. (2013). Chemotherapy, targeted agents, antiemetics and growth-factors in human milk: How should we counsel cancer patients about breastfeeding?. Cancer Treat Rev.
2 Urbaniak C, McMillan A, Angelini M, et al. (2014). Effect of chemotherapy on the microbiota and metabolome of human milk, a case report. Microbiome.
3 Krutsch K, Adams K, Shinwari M, et al. (2023). Persistence of oxaliplatin transfer into human milk: A case report. Breastfeed Med.
4 Stopenski S, Aslam A, Zhang X, et al. (2017). After chemotherapy treatment for maternal cancer during pregnancy, is breastfeeding possible?. Breastfeed Med.

## Substance Identification

### Substance Name

Oxaliplatin

### CAS Registry Number

61825-94-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Platinum Compounds